# Methazolamide

CASRN: 554-57-4

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of methazolamide during breastfeeding. The American, Canadian and French professional guidelines consider carbonic anhydrase inhibitors acceptable in breastfeeding.[1,2] However, an alternate drug with more published information may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Acetazolamide, Dorzolamide

### References

1 Belkin A, Chen T, DeOliveria AR, et al. A practical guide to the pregnant and breastfeeding patient with glaucoma. Ophthalmol Glaucoma 2020;3:79-89.32672600
2 Blumen-Ohana E, Sellem E. Pregnancy & glaucoma: SFO-SFG recommendations. J Fr Ophtalmol 2020;43:63-6.31813552

## Substance Identification

### Substance Name

Methazolamide

### CAS Registry Number

554-57-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antiglaucoma Agents

Carbonic Anhydrase Inhibitors

Diuretics